# Urea C 14

CASRN: 594-05-8

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of urea C 14 as a diagnostic agent. No information is available on the use of urea C 14 during breastfeeding. However, administration of urea C 14 directly to pediatric patients is considered to be safe.[1] International guidelines state that breastfeeding need not be interrupted after administration of urea C 14.[2]

### Drug Levels

Carbon 14 is a low-energy beta emitter with a physical half-life of about 5730 years.[3]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Urea C 13

### References

1 Pathak CM, Kaur B, Khanduja KL. (2010). 14C-urea breath test is safe for pediatric patients. Nucl Med Commun.
2 Mattsson S, Johansson L, Leide Svegborn S, et al. (2015). Radiation dose to patients from radiopharmaceuticals: A compendium of current information related to frequently used substances. ICRP Publication 128. Annex D. Recommendations on breast-feeding interruptions. Ann ICRP.
3 Leide-Svegborn S, Ahlgren L, Johansson L, et al. (2016). Excretion of radionuclides in human breast milk after nuclear medicine examinations. Biokinetic and dosimetric data and recommendations on breastfeeding interruption. Eur J Nucl Med Mol Imaging.

## Substance Identification

### Substance Name

Urea C 14

### CAS Registry Number

594-05-8

### Drug Class

Breast Feeding

Lactation

Radiopharmaceuticals

Carbon Radioisotopes

Urea

Diagnostic Agents